# Droperidol

CASRN: 548-73-2

## Drug Levels and Effects

### Summary of Use during Lactation

Because little information is available on the long-term use of droperidol during breastfeeding, an alternate drug may be preferred, especially while nursing a newborn or preterm infant. Single-dose or short-term use during breastfeeding, such as during surgery, is unlikely to adversely affect the breastfed infant, especially if the infant is older than 2 months.[1] When multiple doses are given to the mother, monitor the infant for drowsiness, especially in younger, exclusively breastfed infants and when using combinations of psychotropic drugs.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

A randomized study compared the breastfed infants born by cesarean section whose mothers received either morphine or morphine plus droperidol by patient-controlled analgesia postoperatively. On days 1 and 2 of life, the infants whose mothers received droperidol had a lower neonatal neurologic and adaptive capacity score (NACS) than those who received morphine only.[2]

One breastfed (extent not stated) infant whose mother was taking droperidol had a somewhat decreased intellectual development on testing, but her mother had also taken olanzapine, clonazepam, sertraline, thioridazine and valproic acid while breastfeeding.[3]

### Effects on Lactation and Breastmilk

Hyperprolactinemia has been reported in patients taking long-term droperidol and after short-term use during surgical procedures.[4-7] The maternal prolactin level in a mother with established lactation may not affect her ability to breastfeed.

### References

1 Spigset O. Anaesthetic agents and excretion in breast milk. Acta Anaesthesiol Scand 1994;38:94-103.8171959
2 Bonhomme V, Brichant JF, Wuilmart M, et al. Droperidol reduces nausea after caesarean section but alters the neurological status of the breastfed infants. Anesthesiology 2002;96:A1044.
3 Gardiner SJ, Kristensen JH, Begg EJ, et al. Transfer of olanzapine into breast milk, calculation of infant drug dose, and effect on breast-fed infants. Am J Psychiatry 2003;160:1428-31.12900304
4 Langer G, Puhringer W. Haloperidol and droperidol treatment in schizophrenics. Clinical application of the "prolactin-model". Acta Psychiatr Belg 1980;80:574-83.7234451
5 Smith S, Wheeler MJ, Murray R, et al. The effects of antipsychotic-induced hyperprolactinaemia on the hypothalamic-pituitary-gonadal axis. J Clin Psychopharmacol 2002;22:109-14.11910254
6 Naito Y, Tamai S, Fukata J, et al. Comparison of endocrinological stress response associated with transvaginal ultrasound-guided oocyte pick-up under halothane anaesthesia and neuroleptanaesthesia. Can J Anaesth 1989;36:633-6.2555076
7 Jullien Y, de Rodez M, Bonardet A, et al. Comparison of postoperative blood levels of prolactin and somatotropin after two methods of anesthesia. Ann Anesthesiol Fr 1980;21:459-66.6110401

## Substance Identification

### Substance Name

Droperidol

### CAS Registry Number

548-73-2

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiemetics

Antipsychotic Agents

Butyrophenones

Dopamine Antagonists

Gastrointestinal Agents